# Tiagabine

CASRN: 115103-54-3

## Drug Levels and Effects

### Summary of Use during Lactation

Monitor the infant for drowsiness, adequate weight gain, and developmental milestones, especially in younger, exclusively breastfed infants and when using combinations of anticonvulsant or psychotropic drugs. Because there is very limited published experience with tiagabine during breastfeeding, other agents may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

One mother breastfed her infant while taking tiagabine 24 mg and then 20 mg daily.[1]

No adverse effects were reported in 10 newborns who were 4 to 23 days old who were breastfed during maternal intake of levetiracetam 1000 to 3000 mg daily. One mother was also taking tiagabine 30 mg daily, clobazam 45 mg daily and oxcarbazepine 600 mg daily.[2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Seizure Disorder) Carbamazepine, Divalproex, Gabapentin, Lamotrigine, Oxcarbazepine, Phenytoin, Valproic Acid

### References

1 Neppe VM. Successful tiagabine monotherapy during pregnancy and lactation: Clinical and serum data. Epilepsia 2000;41 (Suppl 7):200-1. doi:10.1111/j.1528-1157.2000.tb01727.x
2 Tomson T, Palm R, Kallen K, et al. Pharmacokinetics of levetiracetam during pregnancy, delivery, in the neonatal period, and lactation. Epilepsia 2007;48:1111-6.17381438

## Substance Identification

### Substance Name

Tiagabine

### CAS Registry Number

115103-54-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticonvulsants

GABA Agents

Neurotransmitter Uptake Inhibitors

Neuroprotective Agents